# Lisocabtagene Maraleucel

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lisocabtagene maraleucel during breastfeeding nor on breastfeeding after CAR-T cell therapy with lisocabtagene maraleucel. However, some information on other agents indicates that breastfeeding might be acceptable after CAR-T cell therapy. If breastfeeding is attempted following lisocabtagene maraleucel CAR T-cell therapy, infants should be monitored carefully, particularly with B- and T-cell counts and immunoglobulin (IgA, IgG and IgM) blood levels.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Axicabtagene Ciloleucel

## Substance Identification

### Substance Name

Lisocabtagene Maraleucel

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunotherapy, Adoptive

Antineoplastic Agents

Genetic Therapy